# Imipenem and Cilastatin

CASRN: 92309-29-0

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that imipenem produces low levels in milk that are not expected to cause adverse effects in breastfed infants. Occasionally disruption of the infant's gastrointestinal flora, resulting in diarrhea or thrush has been reported with beta-lactams, but these effects have not been adequately evaluated. Imipenem-cilastatin and imipenem-cilastatin-relebactam are acceptable in nursing mothers.

### Drug Levels

Maternal Levels. Imipenem 500 mg and cilastatin 500 mg were infused intravenously over 30 minutes in 12 women. Imipenem appeared in the milk in concentrations of 0.21 to 0.52 mg/L between 1 and 5 hours after the dose in 10 of the women. The drug was usually detectable in only 1 to 3 of the samples taken hourly for 6 hours. In one woman, imipenem was undetectable (<0.2 mg/L) at all times up to 6 hours after the dose. Another woman had a detectable milk imipenem level of 1.84 mg/L only at 4 hours after the dose. Cilastatin was undetectable (<0.5 mg/L) in milk at all times in all women.[1]

Imipenem 500 mg and cilastatin 500 mg were infused intravenously over 30 minutes in 11 women. Seventy-six milk samples were obtained over the 6 hours following a dose. Imipenem was detectable in milk primarily at 2 to 4 hours after the dose. On average, the highest milk levels occurred 3 hours after the dose. All milk concentrations were less than 1 mg/L at all times up to 6 hours after the dose. The drug was undetectable in the milk of some women. Cilastatin was not measured.[2]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Ito K, Izumi K, Takagi H, et al. Fundamental and clinical evaluation of imipenem/cilastatin sodium in the perinatal period. Jpn J Antibiot 1988;41:1778-85.3210308
2 Matsuda S, Suzuki M, Oh K, et al. Pharmacokinetic and clinical studies on imipenem/cilastatin sodium in the perinatal period. A study of imipenem/cilastatin sodium in the perinatal co-research group. Jpn J Antibiot 1988;41:1731-41.3062205

## Substance Identification

### Substance Name

Imipenem and Cilastatin

### CAS Registry Number

92309-29-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antibacterial Agents

Carbapenems